# Tinidazole

CASRN: 19387-91-8

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of tinidazole in milk are less than doses given to infants. Measurements of infant plasma levels during breastfeeding have not been reported. No studies have evaluated adverse effects of tinidazole on the infant during breastfeeding, but presumably they are similar to those of the closely related drug, metronidazole, such as increased risk of oral and rectal Candida infections.

As with metronidazole, concern has been raised about exposure of healthy infants to tinidazole via breastmilk,[1] because of possible mutagenicity and carcinogenicity. Opinions vary among experts on the advisability of using tinidazole during longer-term therapy while breastfeeding, but avoidance of breastfeeding for 3 days after a single dose should allow milk levels to drop to negligible values.[2] Other drugs are available for bacterial vaginosis, and can be given vaginally, which should result in lower amounts in breastmilk.

### Drug Levels

Maternal Levels. Three women were given tinidazole 150 orally twice daily starting on day 4 postpartum. On day 7, milk samples were collected at 2, 5 and 9 hours after a dose. Breastmilk concentrations ranged between 5.8 and 12.7 mg/L.[3]

Twenty-four women who delivered by cesarean section were given a single intravenous dose of tinidazole 500 mg after cord clamping. Colostrum levels of tinidazole averaged 5.8 mg/L at 12 hours after the dose, 3.5 mg/L at 24 hours, 1.2 mg/L at 48 hours and 0.3 mg/L at 72 hours after the dose. The drug was barely detectable 96 hours after the dose. Only slight differences existed between concentrations in fore- and hindmilk.[4]

Five women who delivered by cesarean section were given a single intravenous dose of tinidazole 1600 mg after cord clamping. Milk concentrations and volumes were measured for 96 hours after the dose. The authors concluded that milk concentrations would be sufficiently low to commence breastfeeding 72 hours after the dose.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Anaerobic bacterial infections) Amoxicillin and Clavulanic Acid, Clindamycin, Doxycycline; (Bacterial Vaginosis) Clindamycin, Metronidazole; (Giardiasis) Metronidazole

### References

1 American Academy of Pediatrics Committee on Drugs. (2001). The transfer of drugs and other chemicals into human milk. Pediatrics.
2 Evaldson GR, Lindgren S, Nord CE, et al. (1985). Tinidazole milk excretion and pharmacokinetics in lactating women. Br J Clin Pharmacol.
3 Wood BA, Faulkner JK, Monro AM. (1982). The pharmacokinetics, metabolism and tissue distribution of tinidazole. J Antimicrob Chemother.
4 Männistö PT, Karhunen M, Koskela O, et al. (1983). Concentrations of tinidazole in breast milk. Acta Pharmacol Toxicol (Copenh).

## Substance Identification

### Substance Name

Tinidazole

### CAS Registry Number

19387-91-8

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Antibacterial Agents

Antiprotozoal Agents

Nitroimidazoles